# Enflurane

CASRN: 13838-16-9

## Drug Levels and Effects

### Summary of Use during Lactation

There is no published experience with enflurane during breastfeeding. Because the serum half-life of enflurane in the mother is short and the drug is not expected to be absorbed by the infant, no waiting period or discarding of milk is required.[1] Breastfeeding can be resumed as soon as the mother has recovered sufficiently from general anesthesia to nurse.[2] When a combination of anesthetic agents is used for a procedure, follow the recommendations for the most problematic medication used during the procedure. In one study, breastfeeding before general anesthesia induction reduced requirements of sevoflurane and propofol compared to those of nursing mothers whose breastfeeding was withheld or nonnursing women.[3] It is possible that requirements for other anesthetic agents would be affected similarly.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A randomized study compared the effects of cesarean section using general anesthesia, spinal anesthesia, or epidural anesthesia, to normal vaginal delivery on serum prolactin and oxytocin as well as time to initiation of lactation. General anesthesia was performed using propofol 2 mg/kg and rocuronium 0.6 mg/kg for induction, followed by sevoflurane and rocuronium 0.15 mg/kg as needed. After delivery, patients in all groups received an infusion of oxytocin 30 international units in 1 L of saline, and 0.2 mg of methylergonovine if they were not hypertensive. Fentanyl 1 to 1.5 mcg/kg was administered after delivery to the general anesthesia group. Patients in the general anesthesia group (n = 21) had higher post-procedure prolactin levels and a longer mean time to lactation initiation (25 hours) than in the other groups (10.8 to 11.8 hours). Postpartum oxytocin levels in the nonmedicated vaginal delivery group were higher than in the general and spinal anesthesia groups.[4]

A retrospective study of women in a Turkish hospital who underwent elective cesarean section deliveries compared women who received bupivacaine spinal anesthesia (n = 170) to women who received general anesthesia (n = 78) with propofol for induction, sevoflurane for maintenance and fentanyl after delivery. No differences in breastfeeding rates were seen between the groups at 1 hour and 24 hours postpartum. However, at 6 months postpartum, 67% of women in the general anesthesia group were still breastfeeding compared to 81% in the spinal anesthesia group, which was a statistically significant difference.[5]

### Alternate Drugs to Consider

Desflurane, Isoflurane, Sevoflurane

### References

1 Lee JJ, Rubin AP. (1993). Breast feeding and anaesthesia. Anaesthesia.
2 Dalal PG, Bosak J, Berlin C. (2014). Safety of the breast-feeding infant after maternal anesthesia. Paediatr Anaesth.
3 Bhaskara B, Dayananda VP, Kannan S, et al. (2016). Effect of breastfeeding on haemodynamics and consumption of propofol and sevoflurane: A state entropy guided comparative study. Indian J Anaesth.
4 Kutlucan L, Seker IS, Demiraran Y, et al. (2014). Effects of different anesthesia protocols on lactation in the postpartum period. J Turk Ger Gynecol Assoc.
5 Karasu D, Yilmaz C, Ozgunay SE, et al. (2018). A comparison of the effects of general anaesthesia and spinal anaesthesia on breastfeeding. C R Acad Bulg Sci.

## Substance Identification

### Substance Name

Enflurane

### CAS Registry Number

13838-16-9

### Drug Class

Breast Feeding

Lactation

Anesthetics, Inhalation